# Brepocitinib

CASRN: 1883299-62-4

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the clinical use of brepocitinib during breastfeeding. Because of the potential for serious adverse reactions in the breastfed infant, including infections, GI perforation, and malignancy, breastfeeding is not recommended during treatment with brepocitinib and for 3 days after the last dose.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

## Substance Identification

### Substance Name

Brepocitinib

### CAS Registry Number

1883299-62-4

### Drug Class

Breast Feeding

Lactation

Milk, Human

Enzyme Inhibitors

Protein Kinase Inhibitors

Signal Transduction Inhibitors

Janus Kinase Inhibitors

JAK Inhibitors

Tyrosine Kinase Inhibitors